# Sunscreens

## Drug Levels and Effects

### Summary of Use during Lactation

Sunscreen ingredients vary considerably from product to product and country to country. It is best to look for the individual sunscreen chemical(s) in a specific product than to rely on brand names. Organic chemical sunscreens are absorbed systemically when applied to human skin. Most organic chemical sunscreens are detectable in breastmilk, but the amounts that an infant would ingest are usually lower than current limits of concern.[1-5] Products containing octinoxate, enzacamene, and especially oxybenzone should probably be avoided during breastfeeding because of their possible endocrine-disrupting effects.[5,6] Inorganic mineral sunscreens containing titanium dioxide and zinc oxide may be better alternatives for nursing mothers.[6] Avoiding sun exposure during the mid-day peak ultraviolet (UV) hours, sitting in shaded areas such as under umbrellas, and wearing sun-protective clothing, such as wide-brimmed hats, long sleeves, and long pants can reduce the need for chemical sunscreens.

### Drug Levels

Studies of sunscreens in human milk have use donated milk samples to test sunscreen detection capabilities of chemistry laboratory instruments. These studies were not designed to determine maternal sunscreen exposure or “dose” prior to milk collection and can therefore not answer questions regarding how much of a given sunscreen applied over a given surface area of skin on a lactating mother will be present in her milk.[1-4]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Rodríguez-Gómez R, Zafra-Gómez A, Dorival-García N, et al. Determination of benzophenone-UV filters in human milk samples using ultrasound-assisted extraction and clean-up with dispersive sorbents followed by UHPLC-MS/MS analysis. Talanta 2015;134:657-64 25618719
2 Molins-Delgado D, Olmo-Campos MDM, Valeta-Juan G, et al. Determination of UV filters in human breast milk using turbulent flow chromatography and babies' daily intake estimation. Environ Res 2017;161:532-9 29232646
3 Liu Y, Gao L, Qiao L, et al. Concentrations, compound profiles, and possible sources of organic UV filters in human milk in China. Environ Sci Technol 2022;56:15930-40 36260437
4 Alcaraz MR, Espinosa-Mansilla A, Durán-Merás I, et al. An optimized methodology for the determination of multiclass organic ultraviolet sunscreens and metabolites in human milk through chromatographic and chemometric resolution. Talanta 2024;270:125560 38128275
5 Ruszkiewicz JA, Pinkas A, Ferrer B, et al. Neurotoxic effect of active ingredients in sunscreen products, a contemporary review. Toxicol Rep 2017;4:245-59 28959646
6 Sunscreens. Med Lett Drugs Ther 2025;67:97-102 40512609

## Substance Identification

### Substance Name

Sunscreens

### Drug Class

Breast Feeding

Lactation

Milk, Human

Sunscreening Agents